# Betrixaban

CASRN: 330942-05-7

## Drug Levels and Effects

### Summary of Use during Lactation

Betrixaban is no longer marketed in the United States. Because no information is available on the use of betrixaban during breastfeeding and the drug is orally absorbable, an alternate drug is preferred, especially while nursing a newborn or preterm infant.[1,2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acenocoumarol, Dalteparin, Enoxaparin, Heparin, Rivaroxaban, Warfarin

### References

1 Vanassche T, Vandenbriele C, Peerlinck K, et al. (2015). Pharmacotherapy with oral Xa inhibitors for venous thromboembolism. Expert Opin Pharmacother.
2 Cohen H, Arachchillage DR, Beyer-Westendorf J, et al. (2016). Direct oral anticoagulants and women. Semin Thromb Hemost.

## Substance Identification

### Substance Name

Betrixaban

### CAS Registry Number

330942-05-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticoagulants

Antithrombins